# Oliceridine

CASRN: 1401028-24-7

## Drug Levels and Effects

### Summary of Use during Lactation

Oliceridine is not marketed in the United States. No information is available on the use of oliceridine during breastfeeding. A pharmacokinetic model predicts low levels in milk during the newborn period; however, until more information is available, an alternate drug may be preferred.

### Drug Levels

Maternal Levels. A physiologically based pharmacokinetic model was constructed for oliceridine during the first 24 hours after cesarean delivery. The model predicted an RID between 0.31% and 1.24%, depending on the assumptions that were made about the milk-to-plasma ratio and milk intake.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Butorphanol, Fentanyl, Hydromorphone, Ibuprofen, Morphine

### References

1 Ding Y, Liu K, Zhang S, . PBPK-Based Prediction of Oliceridine Exposure in Breast Milk and Relative Infant Dose During the First 24 h After Cesarean Delivery. J Clin Pharmacol 2026;66:e70228.42678308

## Substance Identification

### Substance Name

Oliceridine

### CAS Registry Number

1401028-24-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesics, Opioid